# Dimethyl Sulfone

CASRN: 67-71-0

## Drug Levels and Effects

### Summary of Use during Lactation

Dimethyl sulfone (methylsulfonylmethane; MSM) is a normal oxidative metabolite found in the bloodstream and breastmilk. It is a metabolic product of endogenous methanethiol metabolism and intestinal bacterial metabolism. No studies have been done on the use of dimethyl sulfone (MSM) orally in nursing mothers, but its topical use and low toxicity indicate that it is unlikely to harm the breastfed infant.

### Drug Levels

Maternal Levels. Four human milk samples were obtained from four healthy nursing women (one sample from each mother) at a mean of 80 days postpartum. The amounts of dimethyl sulfone were less in their milk than in infant formulas derived from cow’s milk.[1]

In a study of the milk of 429 Finnish mothers, milk levels of dimethyl sulfone ranged from 0.9 to 1.2 mcg/L.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Meoni G, Tenori L, Luchinat C. Nuclear magnetic resonance-based metabolomic comparison of breast milk and organic and traditional formula milk brands for infants and toddlers. Omics 2020;24:424-36.32522087
2 Kortesniemi M, Slupsky CM, Aatsinki AK, et al. Human milk metabolome is associated with symptoms of maternal psychological distress and milk cortisol. Food Chem 2021;356:129628.33836356

## Substance Identification

### Substance Name

Dimethyl Sulfone

### CAS Registry Number

67-71-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Inflammatory Agents